# Ferric Citrate

CASRN: 2338-05-8

## Drug Levels and Effects

### Summary of Use during Lactation

Iron is a normal component of human milk. Studies on various forms of iron indicate that breastmilk levels are not increased greatly after exogenous administration. No special precautions are necessary. For additional information on iron use during breastfeeding, see the monograph on Iron Salts.

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Ferric Carboxymaltose, Ferric Derisomaltose, Iron Sucrose

## Substance Identification

### Substance Name

Ferric Citrate

### CAS Registry Number

2338-05-8

### Drug Class

Breast Feeding

Lactation

Milk, Human

Ferric Compounds

Hematinics

Iron Compounds

Minerals